# Citalopram

CASRN: 59729-33-8

## Drug Levels and Effects

### Summary of Use during Lactation

Infants receive citalopram in breastmilk, and it is detectable in low levels in the serum of some. The dosage that the infant receives and serum level achieved are probably related to the genetic metabolic capacity of the mother and infant. A few cases of minor behavioral side effects such as drowsiness or fussiness have been reported, but no adverse effects on development have been found in infants followed for up to 5 years. Infants exposed in utero can have withdrawal effects postpartum despite breastfeeding and continued maternal citalopram use.[1,2] If citalopram is required by the mother, it is not a reason to discontinue breastfeeding. Some experts do not recommend citalopram during nursing,[3] but a safety scoring system finds citalopram to be acceptable during breastfeeding.[4] If the mother was taking citalopram during pregnancy or if other antidepressants have been ineffective, most experts recommend against changing medications during breastfeeding. Otherwise, agents with lower excretion into breastmilk may be preferred, especially while nursing a newborn or preterm infant. Monitor the infant for excess drowsiness, restlessness, irritability, poor feeding and poor weight gain, especially in younger, exclusively breastfed infants and when using combinations of psychotropic drugs.

Mothers taking an SSRI during pregnancy and postpartum may have more difficulty breastfeeding, although this might be a reflection of their disease state.[5] These mothers may need additional breastfeeding support. Breastfed infants exposed to an SSRI during the third trimester of pregnancy are at risk for neonatal withdrawal syndrome consisting of hypoglycemia, tremors, tachycardia, or hypotonia, and might be at a greater risk of readmission due to jaundice.[6,7]

### Drug Levels

Citalopram is metabolized to 2 metabolites, each having antidepressant activity considered to be 13% that of citalopram.[8]

Maternal Levels. In a pooled analysis of serum levels from published studies and 2 unpublished cases, the authors found that 18 mothers taking an average daily dosage of 29 mg (range 20 to 60 mg) had an average milk citalopram level of 157 mcg/L (range 41 to 451 mcg/L).[8] Using the average dosage and milk level data from this paper, an exclusively breastfed infant would receive an estimated 7.9% of the maternal weight-adjusted dosage of citalopram.

A woman with postpartum depression was given citalopram 20 mg daily for 2 days, then 40 mg daily. After 8 days of therapy, a breastmilk sample contained 98.9 mcg/L of citalopram.[9]

In 9 mothers taking citalopram 20 to 40 mg daily while breastfeeding, trough milk samples were taken immediately before nursing on the morning of day 4, and during week 2 and month 2 postpartum. Citalopram milk trough concentrations standardized to a dosage of 20 mg daily averaged 81.4, 103.4 and 75.9 mcg/L at the 3 sampling times. The authors reported that an exclusively breastfed infant would receive an estimated minimum of 0.3 and 0.2 % of the maternal weight-adjusted dosage of citalopram at 2 weeks and 2 months postpartum, respectively.[10] However, these values appear to be the result of a calculation error. Using the milk concentration values above, one can calculate a minimum infant dosage of 4.7 and 3.4% of the weight-adjusted maternal dosage which is consistent with values reported in other studies.

In 10 breastfed (extent not stated) infants (including one pair of twins) aged 3 to 42 weeks whose mothers were taking an average daily dosage of 24 mg (range 20 to 50 mg) of citalopram, the authors calculated that their fully breastfed infants would receive an average of 5.2% (range 2.5 to 9.4%) of the maternal dosage.[11]

A mother was taking oral citalopram 40 mg once daily in the evening. Single milk samples were obtained 16 hours after the dose on days 25, 46 and 53 postpartum. Milk citalopram levels were 280, 230 and 320 mcg/L. These values represent 5.8%, 4.7% and 6.6% of the maternal weight-adjusted dosage.[1]

A nursing mother was taking citalopram 20 mg daily. Foremilk and hindmilk samples taken at 4 weeks postpartum, 11 hours after a dose contained 123 mcg/L and 131 mcg/L, respectively. The samples also contained 25 mcg/L and 31 mcg/L of desmethylcitalopram in foremilk and hindmilk, respectively.[12]

Two women treated with citalopram 5 or 10 mg daily during the third trimester of pregnancy and during breastfeeding provided trough milk samples during the first week postpartum. The citalopram milk levels were 62.6 mcg/L with the 5 mg dose and 95.4 mcg/L with the 10 mg dose. The calculated weight-adjusted percentage of maternal dosages were 18.4% and 13.2%, respectively. These values might be inaccurate because of the timing of milk sample collection.[13]

Random milk samples were obtained from 6 women taking a median dosage of 20 mg (range 10 to 30 mg) of citalopram daily had a median citalopram milk concentration of 111.5 mcg/L (range 41.5 to 260 mcg/L). The authors calculated that this represents a median infant dosage of 16.7 (range 6.2 to 39) mcg/kg daily. No correlation was found between maternal dosage and milk citalopram level.[14]

Thirteen mothers taking citalopram in an average dosage of 21 mg daily (range 10 to 40 mg daily) provided milk samples for analysis. Samples of milk from the complete emptying of one breast were collected 3 times over a 2-day period at predefined times between just before a dose and 14 hours after a dose, with each participant collecting samples at different times. The average milk concentration was 119 mcg/L (range 36 to 274 mcg/L) resulting in an average infant daily dosage of 16 mcg/kg and a relative infant dosage of 6%.[15]

Infant Levels. In a pooled analysis of 5 mother-infant pairs from published and unpublished cases, the authors found that infants had an average of 7% of their mothers’ citalopram plasma levels; 1 of the 5 infants had a plasma level greater than 10% of the mother’s plasma level which was defined by the authors as being elevated.[8]

A woman with postpartum depression was given citalopram 20 mg daily for 2 days, then 40 mg daily. Sixteen days later, her breastfed infant had a serum level of 12.7 mcg/L. Because of difficult sleep in the infant, the mother’s dosage was decreased to 20 mg daily. After 1 week at this dosage, the infant’s serum citalopram was 4.5 mcg/L and the infant’s sleep normalized.[9]

The breastfed infants of 9 mothers who took citalopram during pregnancy and postpartum had serum citalopram levels that were 63% of maternal serum levels at delivery. The infants’ serum levels fell by 37% by day 2, 61% by day 4, and 90% by week 2, despite exclusive breastfeeding. At 2 months of age, infant citalopram serum levels were about 2% of those of the mother; metabolite serum levels were somewhat higher.[10]

In 10 breastfed (extent not stated) infants aged 3 to 42 weeks whose mothers were taking citalopram in an average daily dosage of 24 mg (range 20 to 50 mg), citalopram was detected in 6 of the infants. The serum drug levels of the 10 infants averaged 0.9% (range 0 to 4.8%) of those of their mothers. Two of the infants with detectable citalopram were twins whose mother was a poor metabolizer of citalopram (CYP2C19*2 mutation). Five infants with the CYP2C19*1/*2 genotype had serum levels that were 3.75 times higher than the other 5 infants with the CYP2C19*1/*1 genotype.[11]

A mother was taking oral citalopram 40 mg once daily at 11 pm. Infant serum levels were measured at 12, 25 and 53 days of age, the first at an unspecified time and the latter two at 3 pm. Infant citalopram serum levels were 2.3, 1.2 and 1.7 mcg/L at these times. The infant serum levels on days 25 and 53 represented 0.9% and 1.8% of the mothers serum levels, respectively.[1]

Thirteen breastfed (extent not stated) infants with an average age of 1.5 months (range 0.7 to 3.3 months) whose mothers were taking an average citalopram dosage of 21 mg daily (range 10 to 40 mg daily) had one blood sample taken for analysis. Their average serum level of sertraline was <2 mcg/L (range <2 to 2.6 mcg/L).[15]

### Effects in Breastfed Infants

The manufacturer states that drowsiness and weight loss in breastfed infants has occurred.

Uneasy sleep that reversed with dosage reduction and partial formula supplementation was probably caused by citalopram in breastmilk in a 5-month-old infant.[9]

A group of 10 infants breastfed (6 exclusive, 3 received some formula beginning at 2 months) from birth to one year during maternal citalopram use had normal body weight and neurological development in all infants compared to 9 control infants whose mothers did not take citalopram.[10]

Three mothers who took an average citalopram dose of 15 mg once daily breastfed their infants exclusively for 4 months and at least 50% during months 5 and 6. Their infants had 6-month weight gains that were normal according to national growth standards.[16]

A study compared adverse reactions in 31 infants breastfed during maternal citalopram use to a control group of 31 breastfed infants whose mothers did not take an antidepressant. There were numerically more adverse events reported in the citalopram group (3 vs 1). However, the study found no statistical difference in the rate of adverse effects between the groups of infants and none of the side effects was serious. One mother reported infant irritability and restlessness after she began citalopram at 2 months postpartum. The side effects subsided after she stopped breastfeeding 2 weeks later.[17]

In 10 breastfed (extent not stated) infants aged 3 to 42 weeks whose mothers were taking citalopram an average of 24 mg daily, no short-term adverse reactions were noted clinically at the time of the study.[11]

A breastfed infant whose mother took citalopram 40 mg daily throughout pregnancy and postpartum had numerous symptoms such as superficial and irregular breathing, apnea, disordered sleep and hypotonia after birth. All symptoms disappeared by 3 weeks of age. Symptoms were judged to likely be withdrawal symptoms rather than side effects of the drug in the breastmilk.[1]

A woman was restarted on citalopram 10 mg daily after having stopped the drug for the last month of pregnancy. Her infant breastfed for 6 months (extent not stated). The infant had no perinatal complications, and the infant’s pediatrician noted no neuropsychological abnormalities at 18 months of age.[18]

A woman took citalopram 60 mg and ziprasidone 40 mg daily throughout pregnancy and postpartum. She breastfed extensively, except for occasional formula feedings by others. At 6 months of age, a pediatrician found the infant to be healthy with normal growth and development.[19]

An uncontrolled online survey compiled data on 930 mothers who nursed their infants while taking an antidepressant. Infant drug discontinuation symptoms (e.g., irritability, low body temperature, uncontrollable crying, eating and sleeping disorders) were reported in about 10% of infants. Mothers who took antidepressants only during breastfeeding were much less likely to notice symptoms of drug discontinuation in their infants than those who took the drug in pregnancy and lactation.[20]

A cohort of 247 infants exposed to an antidepressant in utero during the third trimester of pregnancy were assessed for poor neonatal adaptation (PNA). Of the 247 infants, 154 developed PNA. Infants who were exclusively given formula had about 3 times the risk of developing PNA as those who were exclusively or partially breastfed. Fifty-one of the infants were exposed to citalopram in utero.[21]

A case-control study in Israel compared 280 infants of nursing mothers taking long-term psychotropic drugs to the infants of 152 women taking antibiotics. Infant sleepiness at 4 days of age was reported by 1 mother taking citalopram during pregnancy and breastfeeding and by none taking antibiotics. The sleepiness resolved within 24 hours with no developmental effect.[22]

A mother with mixed anxiety-depressive order was taking sertraline and breastfeeding her 9-month-old infant. Because of side effects, sertraline was stopped and citalopram 10 daily was started. After 2 weeks of therapy, she reported signs of bruxism in her infant who was breastfed 5 to 6 times daily, as well as supplementary feedings such as fruits, vegetables, meat, and biscuits. The infant had sporadic, pulsatile, and momentary movements in her jaws, which usually began with movements of the head, especially during sleep. Furthermore, the mother mentioned her child had a habit of biting and clenching her teeth while awake. Pediatric and dental examinations found no abnormalities, but the dentist observed bruxism during the examination. Citalopram was discontinued and bruxism symptoms resolved after 72 hours. The mother resumed breastfeeding with no return of symptoms and the infant had no bruxism symptoms for the next 2 years.[23] Bruxism was probably caused by citalopram in breastmilk.

In a retrospective cohort study of 5,079 newborns whose mothers took an SSRI during pregnancy, 1.5% of breastfed newborns had neonatal withdrawal compared with 2.3% among the formula-fed newborns, although this did not reach statistical significance. Breastfed newborns had a reduced risk of transfer to the NICU than formula-fed newborns; however, this finding did not persist in sensitivity analysis. Sixteen percent of women in the study were taking citalopram.[24] A further analysis of these data indicated that infants of mothers who took a SSRI during pregnancy and exclusively breastfed had a greater risk of an emergency department visit or readmission to the hospital, primarily due to jaundice.[7]

A secondary analysis of a population study evaluated infant IQ scores with SSRI use postpartum during nursing (n = 22), non-SSRI exposed breastfed infants (n = 37), and non-breastfed infants (n = 38). Of the entire group of mothers, 81 mothers were treated with fluoxetine, 9 with sertraline, 8 with paroxetine, and 2 with citalopram. Children had IQ testing at a mean age of 4.9 years. There were no significant differences in any adjusted mean IQ scores between breastfed children with and without postnatal SSRI exposure.[25]

A pilot study compared the stool of breastfed infants whose mothers were taking an SSRI antidepressant to those of infants whose mothers were not taking an SSRI. One of the 10 women taking an SSRI was taking citalopram. The stools of infants exposed to an SSRI in milk had increases in the genera Gemella, Staphylococcus and Corynebacterium and a decrease in Lactobacillus.[26]

### Effects on Lactation and Breastmilk

The SSRI class of drugs, including citalopram, can cause increased prolactin levels and galactorrhea in nonpregnant, nonbreastfeeding patients.[27-31] In a study of cases of hyperprolactinemia and its symptoms (e.g., gynecomastia) reported to a French pharmacovigilance center, fluvoxamine was found to have a 3.9-fold increased risk of causing hyperprolactinemia compared to other drugs.[32] The prolactin level in a mother with established lactation may not affect her ability to breastfeed.

In a small prospective study, 8 primiparous women who were taking a serotonin reuptake inhibitor (SRI; 3 taking fluoxetine and 1 each taking citalopram, duloxetine, escitalopram, paroxetine or sertraline) were compared to 423 mothers who were not taking an SRI. Mothers taking an SRI had an onset of milk secretory activation (lactogenesis II) that was delayed by an average of 16.7 hours compared to controls (85.8 hours postpartum in the SRI-treated mothers and 69.1 h in the untreated mothers), which doubled the risk of delayed feeding behavior in the untreated group. However, the delay in lactogenesis II may not be clinically important, since there was no statistically significant difference between the groups in the percentage of mothers experiencing feeding difficulties after day 4 postpartum.[33]

A case control study compared the rate of predominant breastfeeding at 2 weeks postpartum in mothers who took an SSRI antidepressant throughout pregnancy and at delivery (n = 167) or an SSRI during pregnancy only (n = 117) to a control group of mothers who took no antidepressants (n = 182). Among the two groups who had taken an SSRI, 33 took citalopram, 18 took escitalopram, 63 took fluoxetine, 2 took fluvoxamine, 78 took paroxetine, and 87 took sertraline. Among the women who took an SSRI, the breastfeeding rate at 2 weeks postpartum was 27% to 33% lower than mother who did not take antidepressants, with no statistical difference in breastfeeding rates between the SSRI-exposed groups.[34]

An observational study looked at outcomes of 2859 women who took an antidepressant during the 2 years prior to pregnancy. Compared to women who did not take an antidepressant during pregnancy, mothers who took an antidepressant during all 3 trimesters of pregnancy were 37% less likely to be breastfeeding upon hospital discharge. Mothers who took an antidepressant only during the third trimester were 75% less likely to be breastfeeding at discharge. Those who took an antidepressant only during the first and second trimesters did not have a reduced likelihood of breastfeeding at discharge.[35] The antidepressants used by the mothers were not specified.

A retrospective cohort study of hospital electronic medical records from 2001 to 2008 compared women who had been dispensed an antidepressant during late gestation (n = 575; citalopram n = 139) to those who had a psychiatric illness but did not receive an antidepressant (n = 1552) and mothers who did not have a psychiatric diagnosis (n = 30,535). Women who received an antidepressant were 37% less likely to be breastfeeding at discharge than women without a psychiatric diagnosis, but no less likely to be breastfeeding than untreated mothers with a psychiatric diagnosis.[36]

In a study of 80,882 Norwegian mother-infant pairs from 1999 to 2008, new postpartum antidepressant use was reported by 392 women and 201 reported that they continued antidepressants from pregnancy. Compared with the unexposed comparison group, late pregnancy antidepressant use was associated with a 7% reduced likelihood of breastfeeding initiation, but with no effect on breastfeeding duration or exclusivity. Compared with the unexposed comparison group, new or restarted antidepressant use was associated with a 63% reduced likelihood of predominant, and a 51% reduced likelihood of any breastfeeding at 6 months, as well as a 2.6-fold increased risk of abrupt breastfeeding discontinuation. Specific antidepressants were not mentioned.[37]

### Alternate Drugs to Consider

Nortriptyline, Paroxetine, Sertraline

### References

1 Franssen EJ, Meijs V, Ettaher F, . Citalopram serum and milk levels in mother and infant during lactation. Ther Drug Monit 2006;28:2-4.16418683
2 Erol S, Ozcan B, Celik IH, . Neonatal abstinence syndrome due to prenatally citalopram exposure: A case report. Arch Argent Pediatr 2017;115:e424-e7.29087127
3 Larsen ER, Damkier P, Pedersen LH, . Use of psychotropic drugs during pregnancy and breast-feeding. Acta Psychiatr Scand Suppl 2015;445:1-28.
4 Uguz F. A new safety scoring system for the use of psychotropic drugs during lactation. Am J Ther 2021;28:e118-e26.30601177
5 Grzeskowiak LE, Leggett C, Costi L, . Impact of serotonin reuptake inhibitor use on breast milk supply in mothers of preterm infants: A retrospective cohort study. Br J Clin Pharmacol 2018;84:1373-9.29522259
6 Wang J, Cosci F. Neonatal withdrawal syndrome following late in utero exposure to selective serotonin reuptake inhibitors: A systematic review and meta-analysis of observational studies. Psychother Psychosom 2021;90:299-307.33971648
7 Cantin C, Li W, Snelgrove-Clarke E, . Examining the effect of newborn feeding method on postnatal length of stay and healthcare utilisation among neonates with in-utero SSRI exposure (NeoWISE): A retrospective cohort study. BMJ Paediatr Open 2026;10:e004689.
8 Weissman AM, Levy BT, Hartz AJ, . Pooled analysis of antidepressant levels in lactating mothers, breast milk, and nursing infants. Am J Psychiatry 2004;161:1066-78.15169695
9 Schmidt K, Olesen OV, Jensen PN. Citalopram and breast-feeding: Serum concentration and side effects in the infant. Biol Psychiatry 2000;47:164-5.10664835
10 Heikkinen T, Ekblad U, Kero P, . Citalopram in pregnancy and lactation. Clin Pharmacol Ther 2002;72:184-91.12189365
11 Berle JØ, Steen VM, Aamo TO, . Breastfeeding during maternal antidepressant treatment with serotonin reuptake inhibitors: Infant exposure, clinical symptoms, and cytochrome P450 genotypes. J Clin Psychiatry 2004;65:1228-34.15367050
12 Weisskopf E, Panchaud A, Nguyen KA, . Simultaneous determination of selective serotonin reuptake inhibitors and their main metabolites in human breast milk by liquid chromatography-electrospray mass spectrometry. J Chromatogr B Analyt Technol Biomed Life Sci 2017;1057:101-9.
13 Pogliani L, Baldelli S, Cattaneo D, . Selective serotonin reuptake inhibitors passage into human milk of lactating women. J Matern Fetal Neonatal Med 2019;32:3020-5.29557689
14 Schoretsanitis G, Augustin M, Sassmannshausen H, . Antidepressants in breast milk; Comparative analysis of excretion ratios. Arch Womens Ment Health 2019;22:383-90.30116895
15 Den Besten-Bertholee D, Touw DJ, Damer EA, . Sertraline, citalopram and paroxetine in lactation: Passage into breastmilk and infant exposure. Front Pharmacol 2024;15:1414677.38841362
16 Hendrick V, Smith LM, Hwang S, . Weight gain in breastfed infants of mothers taking antidepressant medications. J Clin Psychiatry 2003;64:410-2.12716242
17 Lee A, Woo J, Ito S. Frequency of infant adverse events that are associated with citalopram use during breast-feeding. Am J Obstet Gynecol 2004;190:218-21.14749663
18 Gentile S, Vozzi F. Consecutive exposure to lamotrigine and citalopram during pregnancy. Arch Womens Ment Health 2007;10:299-300.17763980
19 Werremeyer A. Ziprasidone and citalopram use in pregnancy and lactation in a woman with psychotic depression. Am J Psychiatry 2009;166:1298.
20 Hale TW, Kendall-Tackett K, Cong Z, . Discontinuation syndrome in newborns whose mothers took antidepressants while pregnant or breastfeeding. Breastfeed Med 2010;5:283-8.20807106
21 Kieviet N, Hoppenbrouwers C, Dolman KM, . Risk factors for poor neonatal adaptation after exposure to antidepressants in utero. Acta Paediatr 2015;104:384-91.25559357
22 Kronenfeld N, Ziv Baran, T, Berlin M, . Chronic use of psychotropic medications in breastfeeding women: Is it safe? PLoS One 2018;13:e0197196.29782546
23 Akbarzadeh F, Behravan G, Modaresi F, . Citalopram-induced sleep bruxism in a breastfed infant: A case report. Front Psychiatry 2023;14:1051346.36816404
24 Cantin C, Li W, Snelgrove-Clarke E, . Neonates With In-Utero SSRI Exposure (NeoWISE): A retrospective cohort study examining the effect of newborn feeding method on newborn withdrawal. Int J Popul Data Sci 2024;9:2458.39679336
25 Heinonen EW, Kao K, Mattson SN, . Cognitive outcomes of children exposed to selective serotonin reuptake inhibitors through breast milk. JAMA Netw Open 2025;8:e2544989.41269692
26 Desorcy-Scherer K, McNamara K, Luellwitz R, . Early insights into maternal antidepressant use and the human infant gut microbiome. Biol Res Nurs 2026;28:406-17.41652998
27 Egberts AC, Meyboom RH, De Koning FH, . Non-puerperal lactation associated with antidepressant drug use. Br J Clin Pharmacol 1997;44:277-81.9296322
28 González Pablos E, Minguez MartÍn L, Hernández Fernández M, . A clinical case of galactorrhoea after citalopram treatment. Actas Esp Psiquiatr 2001;29:414.11730581
29 Koch HJ, Zellmer H. Marked mydriasis and neuritis nervi optici associated with galactorrhea following citalopram treatment: A case report and discussion. Case Rep Med 2011;2011:191735.21869891
30 Belli H, Vardar MK, Yesilyurt S, . Citalopram related euprolactinaemic galactorrhoea: A case report. West Indian Med J 2010;59:100-1.20931925
31 Türkoğlu S. Citalopram-induced galactorrhea in an adolescent. Clin Neuropharmacol 2016;39:331.27438185
32 Trenque T, Herlem E, Auriche P, . Serotonin reuptake inhibitors and hyperprolactinaemia: A case/non-case study in the French pharmacovigilance database. Drug Saf 2011;34:1161-6.22077504
33 Marshall AM, Nommsen-Rivers LA, Hernandez LL, . Serotonin transport and metabolism in the mammary gland modulates secretory activation and involution. J Clin Endocrinol Metab 2010;95:837-46.19965920
34 Gorman JR, Kao K, Chambers CD. Breastfeeding among women exposed to antidepressants during pregnancy. J Hum Lact 2012;28:181-8.22344850
35 Venkatesh KK, Castro VM, Perlis RH, . Impact of antidepressant treatment during pregnancy on obstetric outcomes among women previously treated for depression: An observational cohort study. J Perinatol 2017;37:1003-9.28682318
36 Leggett C, Costi L, Morrison JL, . Antidepressant use in late gestation and breastfeeding rates at discharge from hospital. J Hum Lact 2017;33:701-9.28984528
37 Grzeskowiak LE, Saha MR, Nordeng H, . Perinatal antidepressant use and breastfeeding outcomes: Findings from the Norwegian Mother, Father and Child Cohort Study. Acta Obstet Gynecol Scand 2022;101:344-54.35170756

## Substance Identification

### Substance Name

Citalopram

### CAS Registry Number

59729-33-8

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antidepressive Agents

Serotonin Uptake Inhibitors